# Bedaquiline

CASRN: 843663-66-1

## Drug Levels and Effects

### Summary of Use during Lactation

Data from two women taking bedaquiline and one of their breastfed infants indicate that exposure of the infant to the drug via breastmilk is substantial, with the breastfed infant having a therapeutic plasma level. The clinical consequences of this exposure are unknown. The drug could protect the infant from multidrug-resistant tuberculosis, or could result in adverse effects. Monitor breastfed infants for adverse reactions, such as liver toxicity, nausea, inadequate weight gain, arthralgia, headache, hemoptysis, and chest pain.[1] The manufacturer states that because of the potential for serious adverse reactions in a breastfed infant, breastfeeding is not recommended during treatment and for 27.5 months (5 times the half-life) after the last dose unless infant formula is not available. Donor milk may be a better option.

### Drug Levels

Bedaquiline is metabolized to an N-monodesmethyl metabolite (M2). M2 has 4-fold to 6-fold lower antimycobacterial potency than bedaquiline. After reaching peak equilibrium levels with repeat administration, the mean terminal elimination half-lives of bedaquiline and M2 are approximately 5.5 months.

Maternal Levels. Two mothers taking bedaquiline 200 mg three times weekly provided milk samples after a dose of the drug. Both were also taking linezolid, high-dose isoniazid, levofloxacin, clofazimine, pyrazinamide and ethambutol for tuberculosis, as well as tenofovir, emtricitabine and nevirapine for HIV. One mother’s milk bedaquiline levels between 26.5 and 30.8 hours after a dose were between 5.75 and 8.11 mg/L and M2 levels were between 0.57 and 0.81 mg/L. The second woman had a bedaquiline milk level of 6 mg/L at 6 hours after a dose. Other levels taken at 2, 4 and 48 hours after a dose ranged between 2.6 and 3.2 mg/L. M2 levels at the same times ranged between 2.7 and 3.6 mg/L. A pharmacokinetic model was developed and using the average maternal bedaquiline plasma concentrations, the infant bedaquiline dose would be 0.816 mg/kg daily and the infant M2 dose would be 0.07 mg/kg daily. Based on the average maternal dose of 1.22 mg/kg daily, the estimated relative infant dosage would be about 73% of the maternal dosage.[2]

Infant Levels. One infant was breastfed by a mother who was taking bedaquiline. A single random plasma concentration was similar to the maternal plasma concentration. In 3 other non-breastfed infants aged 6 to 8 weeks who were exposed during pregnancy only, plasma concentrations were detectable but lower than maternal plasma concentrations.[2]

### Effects in Breastfed Infants

A woman who was co-infected with HIV and rifampin-resistant tuberculosis took bedaquiline (dosage not stated) as part of her antituberculosis regimen, which consisted of pyrazinamide and other unnamed drugs. At the 1-month follow-up, the infant was small and not gaining weight well, but the mother was nauseated from her medication regimen and had also lost weight. Six months later after completion of the mother’s therapy, her infant’s weight was increasing, following the normal trajectory of the growth chart, and reaching her developmental milestones.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Loveday M, Hlangu S, Furin J. Breastfeeding in women living with tuberculosis. Int J Tuberc Lung Dis 2020;24:880–91.33156754
2 Court R, Gausi K, Mkhize B, et al. Bedaquiline exposure in pregnancy and breastfeeding in women with rifampicin-resistant tuberculosis. Br J Clin Pharmacol 2022;88:3548–58.35526837

## Substance Identification

### Substance Name

Bedaquiline

### CAS Registry Number

843663-66-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antitubercular Agents